# Acetylcysteine

CASRN: 616-91-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of acetylcysteine during breastfeeding. To avoid infant exposure, nursing mothers may consider pumping and discarding their milk for 30 hours after administration. Acetylcysteine is very minimally absorbed after inhalation, so breastfeeding can be continued and no special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Acetylcysteine

### CAS Registry Number

616-91-1

### Drug Class

- Breast Feeding
- Lactation
- Antidotes
- Expectorants
- Free Radical Scavengers